# Ebastine

CASRN: 90729-43-4

## Drug Levels and Effects

### Summary of Use during Lactation

Ebastine is a nonsedating antihistamine that is not available in the United States, but is available in other countries. Preliminary evidence indicates that the amounts in milk are unlikely to affect a breastfed infant.

### Drug Levels

Ebastine is a pro-drug that is metabolized to the active metabolite, carebastine, which has a much longer half-life than ebastine.

Maternal Levels. A woman with chronic urticaria was taking ebastine 10 mg daily during pregnancy and postpartum. On day 5 postpartum, the highest measured ebastine concentration in breastmilk was 6.3 mcg/L at 3.9 hours after the dose. The highest measured breastmilk carebastine concentration of 5.4 mcg/L occurred at 11.3 hours after administration. At 24.3 hours after the dose, the ebastine concentration was 1.1 mcg/L and the carebastine concentration was 4.4 mcg/L. Based on milk samples obtained at 11.3 hours after the dose, the authors estimated that a fully breastfed infant would receive daily dosages of 0.3 mcg/kg of ebastine and 0.2 mcg/kg of carebastine.[1]

Infant Levels. A woman with chronic urticaria was taking ebastine 10 mg daily during pregnancy and postpartum. At 24 hours after birth, her breastfed infant had an undetectable serum (<0.2 mcg/L) ebastine concentration and a carebastine concentration of 46.8 mcg/L, probably obtained via placental transfer. At 2 days postpartum, both ebastine and carebastine were undetectable in the infant’s serum.[1]

### Effects in Breastfed Infants

A woman with chronic urticaria was taking ebastine 10 mg daily during pregnancy and postpartum. Her infant was exclusively breastfed until the age of 6 months. He showed normal development at 1 and 3 months of age.[1]

### Effects on Lactation and Breastmilk

Antihistamines in relatively high doses given by injection can decrease basal serum prolactin in nonlactating women and in early postpartum women.[2,3] However, suckling-induced prolactin secretion is not affected by antihistamine pretreatment of postpartum mothers.[2] Whether lower oral doses of antihistamines or ebastine have the same effect on serum prolactin or whether the effects on prolactin have any consequences on breastfeeding success have not been studied. The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs to Consider

Cetirizine, Desloratadine, Fexofenadine, Levocetirizine, Loratadine

### References

1 Saito J, Yakuwa N, Sandaiji N, et al. Ebastine during pregnancy and lactation in a patient with chronic urticaria: Ebastine and carebastine levels in maternal serum, cord blood, breast milk, and the infant's serum. J Eur Acad Dermatol Venereol 2020;34:e496-e97.32249465
2 Messinis IE, Souvatzoglou A, Fais N, et al. Histamine H1 receptor participation in the control of prolactin secretion in postpartum. J Endocrinol Invest 1985;8:143-6.3928731
3 Pontiroli AE, De Castro e Silva E, Mazzoleni F, et al. The effect of histamine and H1 and H2 receptors on prolactin and luteinizing hormone release in humans: Sex differences and the role of stress. J Clin Endocrinol Metab 1981;52:924-8.7228996

## Substance Identification

### Substance Name

Ebastine

### CAS Registry Number

90729-43-4

### Drug Class

Breast Feeding

Lactation

Antihistamines

Milk, Human

Nonsedating Antihistamines